# Lusutrombopag

CASRN: 110766-97-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of lusutrombopag during breastfeeding. The manufacturer recommends avoiding breastfeeding during the use of lusutrombopag and for at least 28 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lusutrombopag

### CAS Registry Number

1110766-97-6

### Drug Class

Breast Feeding

Lactation

Receptors, Thrombopoietin